# Suzetrigine

CASRN: 2649467-58-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of suzetrigine during breastfeeding. Because suzetrigine is more than 99% bound to plasma proteins and its active metabolite is more than 96% protein bound, the amounts in milk are likely to be low. If the mother requires suzetrigine, it is not a reason to discontinue breastfeeding. However, until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

## Substance Identification

### Substance Name

Suzetrigine

### CAS Registry Number

2649467-58-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Sodium Channel Blockers